# Thiosulfate Sodium

CASRN: 10102-17-7

## Drug Levels and Effects

### Summary of Use during Lactation

No information is available on the clinical use of sodium thiosulfate during breastfeeding. However, it is not absorbed orally and the reported side effect after oral use is diarrhea. Withholding breastfeeding for 1 to 2 hours after a dose should allow the drug to be cleared from the maternal bloodstream and breastmilk. Observe the infant for diarrhea.

### Drug Levels

Maternal Levels. Relevant published information was not found as of the revision date.

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

## Substance Identification

### Substance Name

Thiosulfate Sodium

### CAS Registry Number

10102-17-7

### Drug Class

Breast Feeding

Lactation

Milk, Human

Antidotes

Chelating Agents